# Edoxaban

CASRN: 480449-70-5

## Drug Levels and Effects

### Summary of Use during Lactation

Two women had low breastmilk levels after taking edoxaban 60 mg daily for 3 days and twin infants were partially breastfed during their mother’s edoxaban use without any bleeding. However, because so little information is available on the use of edoxaban during breastfeeding and the drug is orally absorbable, an alternate drug is preferred, especially while nursing a newborn or preterm infant.[1,2]

### Drug Levels

Maternal Levels. Two women volunteered to take edoxaban 60 mg daily for 3 days and donate milk samples. The average milk concentration over 24 hours was 68.9 mcg/L resulting in an average infant intake of 10.3 mcg/kg daily or a relative infant dose of 1.2%. A physiologically based pharmacokinetic model accurately predicted the milk concentrations.[3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A woman with peripartum cardiomyopathy and severe nonsustained ventricular tachycardia gave birth to twins. Edoxaban 30 mg daily as well as amiodarone, bisoprolol, vonoprazan, febuxostat, imidapril, and pitavastatin were started postpartum. Breastfeeding began 39 days after birth when the daily intake of breastmilk was 160 mL for the first infant and 120 mL for the second, smaller infant. Breastmilk was mixed with infant formula and accounted for approximately one-quarter of their total daily milk intake. The mother breastfed in infants for approximately two months after starting breastfeeding and the infants had no bleeding tendency. At 3 years of age, both infants had a tendency toward obesity, but no other complications or developmental delay.[4]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Acenocoumarol, Dalteparin, Enoxaparin, Heparin, Rivaroxaban, Warfarin

### References

1 Vanassche T, Vandenbriele C, Peerlinck K, . Pharmacotherapy with oral Xa inhibitors for venous thromboembolism. Expert Opin Pharmacother 2015;16:645-58.25554350
2 Cohen H, Arachchillage DR, Beyer-Westendorf J, . Direct oral anticoagulants and women. Semin Thromb Hemost 2016;42:789-97.27706531
3 Patel JP, Butler AS, Mackina G, . Can edoxaban and rivaroxaban be prescribed for breastfeeding mothers? - The New Horizons Clinical Trial. J Thromb Haemost 2026
4 Watanabe C, Wachi T, Kamada S, . Measurement of amiodarone levels in the breast milk of a Japanese woman with peripartum cardiomyopathy. Cureus 2025;17:e89301.40909045

## Substance Identification

### Substance Name

Edoxaban

### CAS Registry Number

480449-70-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anticoagulants

Antithrombins